# Glucosamine

CASRN: 3416-24-8

## Drug Levels and Effects

### Summary of Use during Lactation

Glucosamine is an amino-monosaccharide that is either derived from shellfish or synthetically produced. Glucosamine sulfate has no specific lactation-related uses. It is most commonly used to treat osteoarthritis. A glucosamine derivative, N-acetylglucosamine, is a normal component of human breastmilk. Glucosamine sulfate is well tolerated with occasional gastrointestinal discomfort (e.g., diarrhea, heartburn, nausea, vomiting) reported. Although no studies exist on the use of glucosamine sulfate during breastfeeding, its use by a nursing mother is unlikely to adversely affect the breastfed infant.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. N-acetylglucosamine is a normal component of human breastmilk. One study measured its content in the breastmilk of 8 mothers nursing fullterm infants. Average concentrations ranged from 1,459 mg/L during week 1 postpartum to 646 mg/L during week 13 postpartum. Considerable variation occurred within and between mothers at various times of the day. Two mothers of preterm infants had higher levels of N-acetylglucosamine than the mothers of fullterm infants.[1]

Another study found higher levels of N-acetylglucosamine in the breastmilk of smokers than in nonsmokers.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Miller JB, Bull S, Miller J, et al. (1994). The oligosaccharide composition of human milk: Temporal and individual variations in monosaccharide components. J Pediatr Gastroenterol Nutr.
2 Milnerowicz H, Slowinska M. (1997). Concentration of metals, ceruloplasmin, metallothionein and the activity of N-acetyl-beta-D-glucosamine and gamma-glutamyltransferase in pregnant women who smoke and in those environmentally exposed to tobacco smoke and in their infants. Part I. Int J Occup Med Environ Health.

## Substance Identification

### Substance Name

Glucosamine

### CAS Registry Number

3416-24-8

### Drug Class

Breast Feeding

Lactation

Complementary Therapies